# Vitamin K

CASRN: 84-80-0

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin K is naturally found in human milk. Maternal vitamin K supplementation is typically not needed to meet the 75 mcg per day recommended adequate maternal dietary intake during lactation.[1] Maternal supplementation with 5 mg daily increases milk vitamin K levels and can improve vitamin K status in breastfed infants who also receive intramuscular vitamin K shortly after birth. Although exclusively breastfed infants are at higher risk of vitamin K deficiency bleeding (VKDB), a condition that can involve intracranial hemorrhage, sometimes leading to infant death, maternal vitamin K supplementation alone is not an adequate or safe substitute for vitamin K administered directly to the newborn after birth to prevent VKDB, especially in preterm infants.[2-5]

### Drug Levels

Maternal Levels. Vitamin K is naturally present in human milk in concentrations of 1 to 9 mcg/L (2.2 to 20 nmol/L).[6,7] Similar levels have been reported in colostrum.[6] Levels are approximately 1 mcg/L higher in hindmilk than foremilk.[8] Vitamin K_1_ (phylloquinone) is the predominant form in plasma and milk and derives from maternal dietary plant sources. Vitamin K_2_ (menaquinones) are also present in milk, mainly as menatetrenone (menaquninone-4; MK-4), at approximately one-half the levels of vitamin K_1_.[7,9] Since MK-4 can be synthesized from phylloquinone in the mother, dietary phylloquinone is the main source of milk MK-4.[9] It can also be derived from maternal dietary poultry in countries where vitamin K3 (menadione), a chemical precursor of MK-4, is used in poultry feed.[10] Other menaquinones are synthesized by some bacteria. Their milk levels can be increased in mothers who consume certain fermented foods.[7] Relevant published information regarding vitamin K milk levels in mothers taking MK-4 supplements was not found as of the revision date.

Four lactating mothers were given 0.1, 0.5, 1, or 3 mg single doses of oral vitamin K_1_. Milk was sampled at baseline and then at random times over 2 days after administration in 3 of the mothers and at fixed 6-hour intervals over 1 day in the fourth mother. Baseline milk levels were 2 to 3 mcg/L. Peak milk vitamin K_1_ levels occurred at 12 to 24 hours after administration in all subjects. The highest level reported was approximately 150 mcg/L, occurring 18 hours after a 3 mg dose. Menaquinone levels were not measured.[8]

Eleven lactating mothers between 2 and 6 months postpartum were given a single oral 20 mg vitamin K_1_ supplement and their milk was collected at 0, 12, 24, 48, 96 hours, and 1 week after administration. The average peak milk vitamin K_1_ level was approximately 130 mcg/L at 12 hours after administration compared to 1.1 mcg/L at baseline. By 48 hours the average milk level had decreased to 35 mcg/L, and returned to baseline after 1 week. Menaquinone levels were not measured.[11]

Twenty exclusively breastfeeding mothers were given either 2.5 or 5 mg of oral vitamin K_1_ once daily for 6 weeks beginning within 3 days of delivery. All infants were given 1 mg of intramuscular vitamin K_1_ at birth. Breastmilk samples were collected at baseline and 18 to 24 hours after a dose (peak level) at 2 and 6 weeks. Average milk vitamin K_1_ levels were approximately 1 mcg/L at baseline in both groups, increasing to 27 and 59 mcg/L at 2 weeks, and 22 and 44 mcg/L at 6 weeks, in the 2.5 mg and 5 mg groups, respectively. The same investigators then gave 5 mg or placebo to 22 different exclusively breastfeeding mothers on the same postpartum schedule, but for 12 weeks instead of 6 weeks. At 2, 6 and 12 weeks, average milk vitamin K_1_ levels were approximately 80 mcg/L in the 5 mg group and 1 mcg/L in the placebo group at all three time points. Menaquinone levels were not measured.[12] Using the milk levels reported in this study, an exclusively breastfed infant would receive 12 mcg/kg daily of vitamin K_1_ from a daily 5 mg maternal vitamin K1 dose.

Six lactating mothers of preterm infants ranging from 26 to 30 weeks gestation were given 2.5 mg of oral vitamin K_1_ once daily for 2 weeks beginning at 2 weeks postpartum. Breastmilk vitamin K_1_ was measured at baseline, then daily for 14 days. Milk was collected 6 times a day during routine pumping to calculate a daily average level in the mothers’ milk. The average baseline milk level was 3 mcg/L. This increased to 22.6 mcg/L after 1 day, then gradually increased daily to 64.2 mcg/L on day 6 with no further significant changes. Menaquinone levels were not measured.[13] Based on the highest average level reported in this study, an exclusively maternal breastmilk fed preterm infant would receive 9 mcg/kg daily from a maternal vitamin K1 dose of 2.5 mg daily.

Thirty-one lactating mothers were given 0, 0.8, 2, or 4 mg of oral vitamin K_1_ once daily beginning on postpartum day 4 and continuing until day 16. Milk was sampled at baseline, and then prior to administration on days 8, 16, and 19. At baseline, the average milk vitamin K_1_ level was 6 to 7 mcg/L, and the average milk MK-4 level was 2 to 3 mcg/L in all groups. Milk levels did not significantly change in the control (0 mg) group over time. On day 8 the average vitamin K_1_ levels were 23.3, 41.3, and 88.7 mcg/L, and MK-4 levels were 2.7, 3.8, 9.9 mcg/L in the 0.8, 2 and 4 mg groups, respectively. On day 16 average vitamin K_1_ levels were 24.5, 60.6, and 139.6 mcg/L, and MK-4 levels were 3.5, 5.5, and 16.5 mcg/L, respectively. On day 19, three days after maternal supplement discontinuation, average levels decreased to 12.4, 12.1, and 44.9 mcg/L, and MK-4 decreased to levels of 3.2, 3 and 9 mcg/L, respectively. Only the 4 mg group still had levels higher than the control group on day 19. The authors reported a highly significant correlation between vitamin K_1_ and MK-4 milk levels.[9] Using the highest average milk levels of both vitamin K_1_ and MK-4 reported in this study, an exclusively breastfed infant would receive a daily dosage of 23 mcg/kg of total vitamin K from a maternal 4 mg daily vitamin K_1_ supplement.

Infant Levels. Twenty-two exclusively breastfeeding mothers were given either 5 mg of oral vitamin K_1_ or placebo once daily for 12 weeks beginning within 3 days of delivery. All infants were given 1 mg of intramuscular vitamin K_1_ at birth. Average infant plasma vitamin K_1_ levels were between 2 and 3 mcg/L at 2, 6, and 12 weeks in the 5 mg group compared to between 0.2 and 0.4 mcg/L in the placebo group. Average infant PIVKA-II (des-gamma-carboxy-prothrombin) levels at 12 weeks were 0.42 mcg/L in the 5 mg group compared to 1.48 mcg/L in the placebo group (upper limit of normal is 2 mcg/L). The higher level in the placebo group suggests a relative vitamin K deficiency. Infant prothrombin times at 2, 6, and 12 weeks were not different between the two groups.[12]

### Effects in Breastfed Infants

Exclusive breastfeeding and failure to give infants a dose of prophylactic vitamin K at birth resulted in the death of 3 otherwise normal, consecutive male siblings from intracranial hemorrhage. A fourth male sibling was examined at 17 days of age and found to have abnormal clotting parameters. The infant and parents were found to have no genetic conditions that could account for the abnormal clotting. Within 24 hours, the infant’s clotting profile normalized after 1 mg of vitamin K injection.[3]

### Effects on Lactation and Breastmilk

Exclusive breastfeeding results in inadequate milk vitamin K levels. Failure to give infants a dose of prophylactic vitamin K at birth can result in intracranial bleeding, intra-abdominal bleeding, and death.[5,14]

### Effects in Breastfed Infants

Three consecutive, full term, home-born, male singletons in India from the same set of parents died between 1 to 2 months of age due to intracranial hemorrhage. All three were exclusively breastfed and were not given prophylactic vitamin K at birth. The fourth singleton was pre-emptively examined at 17 days of age and found to have abnormal clotting parameters. The fourth infant and parents were determined to have no genetic conditions that could account for the abnormal clotting. Within 24 hours, the infant’s clotting profile normalized after 1 mg of intramuscular vitamin K injection.[3]

Thirty-seven preterm infants across four UK neonatal intensive care units were given a standard injection of intramuscular vitamin K_1_ after birth. When enteral feedings were initiated, they were fed breastmilk and then eventually breastmilk plus a bovine-derived milk fortifier containing vitamin K, per routine feeding protocol. Prior to discharge home, serum biomarkers of vitamin K status were normal. After discharge at 48 weeks postmenstrual age, 12 were exclusively fed breastmilk only, and 25 were fed formula or mixed breastmilk and formula. In the former group, 67% had abnormal biomarkers indicating vitamin K deficiency, compared to 4% of the latter group. No bleeding events were reported.[15]

A 23-week gestational age preterm female infant in a UK neonatal intensive care unit was fed her mother’s milk plus a human milk derived fortifier. Although she was administered 0.2 mg of vitamin K_1_ after birth, she developed vitamin K deficiency related minor bleeding on postnatal day 73.[16]

### References

1 National Institutes of Health Office of Dietary Supplements. Vitamin K fact sheet for health professionals. 2021 https://ods.od.nih.gov/factsheets/VitaminK-HealthProfessional/
2 Shahrook S, Ota E, Hanada N, . Vitamin K supplementation during pregnancy for improving outcomes: A systematic review and meta-analysis. Sci Rep 2018;8:11459.30061633
3 Mahajan V, Tahlan A, Azad C, . Recurrent intracranial bleed in 3 siblings: Short of a shot of vitamin K! J Pediatr Hematol Oncol 2021;43:e580-e2.32404684
4 Hand I, Noble L, Abrams SA. Vitamin K and the newborn infant. Pediatrics 2022;149:e2021056036.35190810
5 Azar JM, Lambert R, Maffei FA, . Late-onset vitamin K deficiency presenting as haemorrhagic shock and severe multi-system organ failure. BMJ Case Rep 2024;17:e261126.
6 Greer FR. Vitamin K status of lactating mothers and their infants. Acta Paediatr Suppl 1999;88 (Suppl 430):95-103.
7 Kojima T, Asoh M, Yamawaki N, . Vitamin K concentrations in the maternal milk of Japanese women. Acta Paediatr 2004;93:457-63.15188971
8 von Kries, R, Shearer M, McCarthy PT, . Vitamin K1 content of maternal milk: influence of the stage of lactation, lipid composition, and vitamin K1 supplements given to the mother. Pediatr Res 1987;22:513-7.3684378
9 Thijssen HH, Drittij MJ, Vermeer C, . Menaquinone-4 in breast milk is derived from dietary phylloquinone. Br J Nutr 2002;87:219-26.12064330
10 Booth SL. Vitamin K: Food composition and dietary intakes. Food Nutr Res 2012;56:5505.
11 Greer FR, Marshall S, Cherry J, . Vitamin K status of lactating mothers, human milk, and breast-feeding infants. Pediatrics 1991;88:751-6.1896278
12 Greer FR, Marshall SP, Foley AL, . Improving the vitamin K status of breastfeeding infants with maternal vitamin K supplements. Pediatrics 1997;99:88-92.8989344
13 Bolisetty S, Gupta JM, Graham GG, . Vitamin K in preterm breastmilk with maternal supplementation. Acta Paediatr 1998;87:960-2.9764891
14 Ali YK, Ali MN, Ahmed FH, . Late vitamin k deficiency bleeding presenting as subacute subdural hemorrhage in an exclusively breastfed infant: A preventable life-threatening condition-a case report. Clin Case Rep 2026;14:e73365.42639205
15 Clarke P, Shearer MJ, Card DJ, . Exclusively breastmilk-fed preterm infants are at high risk of developing subclinical vitamin K deficiency despite intramuscular prophylaxis at birth. J Thromb Haemost 2022;20:2773-85.36087073
16 Vasu V, Mulla S, Pandya A, . Late-onset vitamin K deficiency bleeding in an extremely preterm infant fed an exclusively human milk-based diet. J Thromb Haemost 2024;22:466-9.37981048

## Substance Identification

### Substance Name

Vitamin K

### CAS Registry Number

84-80-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins

Antifibrinolytic Agents